# Solriamfetol

CASRN: 178429-62-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of solriamfetol during breastfeeding. However, amounts in breastmilk appear to be low and would not be expected to cause any adverse effects in breastfed infants. If solriamfetol is required by the mother, it is not a reason to discontinue breastfeeding. Monitor the breastfed infant for adverse reactions, such agitation, insomnia, and reduced weight gain.

### Drug Levels

Maternal Levels. The manufacturer reports that a single-dose milk and plasma lactation study was conducted in 6 healthy adult lactating women who were between 10 days and 52 weeks postpartum. They were given a single oral 150 mg dose of solriamfetol. The daily infant dose is 0.112 mg/kg based on infant weight of 6 kg. The cumulative median amount excreted in breastmilk was 0.67 mg over 72 hours, which is about 5.5% of the weight-adjusted maternal dose. Of the total amount of solriamfetol excreted in breastmilk over 72 hours, approximately 78% and 98% were excreted by 8 and 24 hours, respectively, with an apparent mean elimination half-life in breast milk of about 5 hours.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Narcolepsy) Amphetamine, Armodafinil, Dextroamphetamine, Lisdexamfetamine, Methylphenidate, Modafinil, Oxybate Salts, Pitolisant

## Substance Identification

### Substance Name

Solriamfetol

### CAS Registry Number

178429-62-4

### Drug Class

Breastfeeding

Lactation

Milk, Human

Adrenergic Agents

Carbamates

Central Nervous System Stimulants

Dopamine Agents

Wakefulness-Promoting Agents